# Lanadelumab

CASRN: 1426055-14-2

## Drug Levels and Effects

### Summary of Use during Lactation

Minimal information available on the clinical use of lanadelumab during breastfeeding indicated no infant harm. Because lanadelumab is a large protein molecule with a molecular weight of about 146,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] If lanadelumab is required by the mother, it is not a reason to discontinue breastfeeding. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An infant was breastfed (extent and duration not stated) by a mother with hereditary angioedema who was using lanadelumab every 3 weeks subcutaneously with no complications. At the age of 2 years, the child was diagnosed with hereditary angioedema but was otherwise healthy.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

C1-esterase inhibitor

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
4 Casanova M, Brüggen MC, Wuillemin WA, et al. Management of pregnancy, delivery and breast-feeding in hereditary angioedema: An analysis of 15 pregnancies with conventional treatment approaches and a case of lanadelumab use. Orphanet J Rare Dis 2026;21:111.41723522

## Substance Identification

### Substance Name

Lanadelumab

### CAS Registry Number

1426055-14-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized